# Levodopa

CASRN: 59-92-7

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that levodopa is poorly excreted into breastmilk and that the sustained-release product may result in a smaller amount of drug transferred to the breastfed infant than with the immediate-release product. Several studies indicate that levodopa can decrease serum prolactin during lactation. The prolactin level in a mother with established lactation may not affect her ability to breastfeed. The effect of long-term use of levodopa on breastfeeding has not been adequately evaluated, although some mothers were able to successfully breastfeed her infant without apparent harm while using relatively low doses of levodopa and carbidopa for Parkinson's disease.

### Drug Levels

Maternal Levels. One mother with Parkinson's disease took sustained-release levodopa 200 mg and carbidopa 50 mg 4 times daily. At 4.5 months postpartum, milk levodopa levels were measured after a morning dose of the drug. The peak levodopa milk level occurred 3 hours after the dose at a concentration of 315 mcg/L and returned to baseline of about 200 mcg/L 6 hours after the dose. On a different day, the same mother was given a single dose of immediate-release levodopa 200 mg and carbidopa 50 mg. The peak levodopa milk level occurred 3 hours after the dose at a concentration of 683 mcg/L and returned to baseline of about 220 mcg/L 6 hours after the dose. The infant was breastfed and weighed before and after each feeding. The infant ingested 0.127 mg and 0.181 mg of levodopa after maternal intake of the sustained- and immediate-release products, respectively.[1] Using data in the article, the infant would receive an average of about 0.3% of the maternal weight-adjusted dosage with the sustained release product and 0.5% of the maternal weight-adjusted dosage with the immediate-release product.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One mother with Parkinson's disease took sustained-release levodopa 200 mg and carbidopa 50 mg 4 times daily. She successfully breastfed her infant whose development was normal at 2 years of age.[1]

A 37-year-old Israeli woman with Parkinson's disease became pregnant while taking a continuous infusion of levodopa 20 mg/mL and carbidopa 5 mg/mL gel. She breastfed her infant for 3 months while receiving the drug, although the extent of breastfeeding and the dosage of the gel is not clear from the paper. At 10 months of age, the infant's psychomotor development was deemed to be normal.[2]

Two women with Parkinson's disease were reported who were taking levodopa and benserazide while breastfeeding. The first took it in an unspecified dosage throughout breastfeeding for 4 months, and had normal early developmental milestones and developed normally up to 10 years of age. The second woman began levodopa 100 mg and benserazide 25 mg three times daily while breastfeeding her 6 month old. At 10 months of age her daughter was healthy and developing well with normal developmental milestones.[3]

### Effects on Lactation and Breastmilk

Levodopa decreases serum prolactin in normal women and those with hyperprolactinemia and can suppress inappropriate lactation in galactorrhea, although not consistently.[4-12] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

One mother with Parkinson's disease took sustained-release levodopa 200 mg and carbidopa 50 mg 4 times daily. She successfully breastfed her infant.[1]

On postpartum day 3, 5 women were given a single oral dose of 500 mg of levodopa or bromocriptine 5 mg followed by a single oral dose of metoclopramide 10 mg 3 hours later. Bromocriptine suppressed basal serum prolactin to a greater extent than levodopa. Over the next 3 hours, serum prolactin increased after metoclopramide in the patients who received levodopa, but not in those who received bromocriptine.[13]

Six women who were 2 to 4 days postpartum, but were not nursing, were given 500 mg of levodopa orally on one day and 100 mg of levodopa plus 35 mg of carbidopa orally on the next day. Both regimens suppressed basal serum prolactin levels. However, levodopa alone caused an 78% decrease in prolactin while the lower dose combination produced only a 51% decrease. The maximal effect occurred about 2 hours after the dose with both regimens.[8]

Seven women in the first week postpartum who were breastfeeding about 7 times daily were given levodopa 500 mg orally and their serum prolactin responses was studied. The following day, they started carbidopa 50 mg orally every 6 hours for 2 days. On the third day, they received a single dose of carbidopa 50 mg plus levodopa 125 mg orally. Decreases in basal serum prolactin occurred by 30 minutes after the levodopa and after 45 minutes with the combination. Decreases were maximum at 120 minutes after the dose and were 62% with levodopa alone and 48% with the combination, although the difference between the 2 regimens was not statistically significant.[14]

A 37-year-old Israeli woman with Parkinson's disease became pregnant while taking a continuous infusion of levodopa 20 mg/mL and carbidopa 5 mg/mL gel. She breastfed her infant for 3 months while receiving the drug, although the extent of breastfeeding and the dosage of the gel is not clear from the paper.[2]

A case series of women with Parkinson’s disease reported on two who were able to breastfeed while taking levodopa.[15]

Two women with Parkinson's disease were reported who were taking levodopa and benserazide while breastfeeding. The first took it in an unspecified dosage throughout breastfeeding for 4 months. The second woman began levodopa 100 mg and benserazide 25 mg three times daily while breastfeeding her 6 month old and continued breastfeeding.[3]

### References

1 Thulin PC, Woodward WR, Carter JH, et al. Levodopa in human breast milk: Clinical implications. Neurology 1998;50:1920-1 9633767
2 Zlotnik Y, Giladi N, Hilel A, et al. Levodopa-carbidopa intestinal gel (LCIG) infusion during pregnancy and delivery: First documented case. Parkinsonism Relat Disord 2014;20:1317-8 25262534
3 Lehn AC, Lee JY, Sciacca G, et al. The management of Parkinson's disease before, during and after pregnancy-an MDS scientific issues committee review. Mov Disord Clin Pract 2026;13:44-59 40832691
4 Ayalon D, Peyser MR, Toaff R, et al. Effect of L-dopa on galactopoiesis and gonadotropin levels in the inappropriate lactation syndrome. Obstet Gynecol 1974;44:159-70 4418555
5 Leblanc H, Yen SS. The effect of L-dopa and chlorpromazine on prolactin and growth hormone secretion in normal women. Am J Obstet Gynecol 1976;126:162-4 961756
6 Board JA, Fierro RJ, Wasserman AJ, et al. Effects of alpha- and beta-adrenergic blocking agents on serum prolactin levels in women with hyperprolactinemia and galactorrhea. Am J Obstet Gynecol 1977;127:285-7 556882
7 Kaulhausen H, Oney T, Leyendecker G. Inhibition of the renin-aldosterone axis and of prolactin secretion during pregnancy by L-dopa. Br J Obstet Gynaecol 1982;89:483-8 7044409
8 Rao R, Scommegna A, Frohman LA. Integrity of central dopaminergic system in women with postpartum hyperprolactinemia. Am J Obstet Gynecol 1982;143:883-7 7102764
9 Malarkey WB, Jacobs LS, Daughaday WH. Levodopa suppression of prolactin in nonpuerperal galactorrhea. N Engl J Med 1971;285:1160-3 5107027
10 Rapoport B, Refetoff S, Fang VS, et al. Suppression of serum thyrotropin (TSH) by l-dopa in chronic hypothyroidism: Interrelationships in the regulation of TSH and prolactin secretion. J Clin Endocrinol Metab 1973;36:256-62 4630270
11 Refetoff S, Fang VS, Rapoport B, et al. Interrelationships in the regulation of TSH and prolactin secretion in man: effects of l-dopa, TRH and thyroid hormone in various combinations. J Clin Endocrinol Metab 1974;38:450-7 4205563
12 Masala A, Alagna S, Devilla L, et al. Muscarinic receptor blockade by pirenzepine: Effect on prolactin secretion in man. J Endocrinol Invest 1982;5:53-5 6808052
13 Nappi C, Mercorio F, Nappi F, et al. Effect of oral administration of metoclopramide on blood levels of prolactin in the puerperium. Arch Ostet Ginecol 1981;86:75-85 7201788
14 Petraglia F, De Leo V, Sardelli S, et al. Prolactin changes after administration of agonist and antagonist dopaminergic drugs in puerperal women. Gynecol Obstet Invest 1987;23:103-9 3583091
15 Armas C, Núñez Y, Gushiken G, et al. Pregnancy in Parkinson's disease (PD): Five cases. Mov Disord 2024;39:S391. doi:10.1002/mds.29952

## Substance Identification

### Substance Name

Levodopa

### CAS Registry Number

59-92-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiparkinson Agents

Dopamine Agents